# Nortriptyline

CASRN: 72-69-5

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of nortriptyline in breastmilk, amounts ingested by the infant are small and usually not been detected in the serum of the infant, although the less active metabolites are often detectable in low levels in infant serum. Immediate side effects have not been reported and a limited amount of follow-up has found no adverse effects on infant growth and development. A safety scoring system finds nortriptyline use to be possible with caution during breastfeeding.[1] Most authoritative reviewers consider nortriptyline one of the preferred antidepressants during breastfeeding.[2-4]

### Drug Levels

Nortriptyline is metabolized to E-10-hydroxynortriptyline and Z-10-hydroxynortriptyline, the antidepressant activity of each considered to be 50% of nortriptyline's.

Maternal Levels. Nortriptyline, a metabolite of amitriptyline, was measured in breastmilk in a mother who was taking amitriptyline 75 mg daily. Her milk levels were 75 and 63 mcg/L at 2 and 10 weeks, respectively, after starting treatment (time after dose not specified). After 19 weeks of therapy, an amitriptyline dose of 25 mg daily produced milk nortriptyline levels that were not detectable (<30 mcg/L).[5]

A mother began taking nortriptyline 125 mg daily immediately postpartum and exclusively breastfed her infant. Milk samples were taken 9 times over 36 hours on days 6 and 7 postpartum. Peak milk nortriptyline levels of about 220 mcg/L occurred 8 hours after the dose, and the average of the 9 milk levels was 180 mcg/L. Milk levels measured on days 20 and 48 postpartum while the mother was taking 125 mg and 75 mg daily, respectively, were similar to the levels on days 6 and 7. Milk levels taken after feeding were much higher than those taken before feeding, probably because of higher concentrations in the more fat-rich hindmilk. The authors estimated that an exclusively breastfed infant would receive 27 mcg/kg daily or 1.3% of the maternal weight-adjusted dosage.[6]

Another mother who was taking amitriptyline 175 mg daily had nortriptyline milk levels of 17 and 20 mcg/L on the morning and evening of the first day of therapy and 87 mcg/L on day 26 of therapy. E-10-hydroxynortriptyline was found in milk in levels averaging 89 mcg/L over this time period.[7]

Infant Levels. In a pooled analysis of 32 mother-infant pairs from published and unpublished cases, the authors found that infants had an average of 10% (range 0 to 24%) of the nortriptyline plasma levels of the mothers'; 1 of the 32 infants had a plasma level greater than 10% of the mother’s, which was defined by the authors as being elevated.[3] In mothers taking 75 to 150 mg daily of nortriptyline, E-10-hydroxynortriptyline was found in levels ranging from barely detectable (<4 mcg/L) to 16 mcg/L in the serum of 5 of 9 breastfed infants and Z-10-hydroxynortriptyline has been detected in levels ranging from barely detectable (<4 mcg/L) to 17 mcg/L in the serum of 5 of 9 breastfed infants.[8,9]

### Effects in Breastfed Infants

At least 44 infants have been reported to have been exposed to nortriptyline in breastmilk with no reports of adverse reactions with maternal dosages from 25 to 175 mg daily.[5,6,8,10-13] The time of initial exposure ranged from the immediate newborn period to 3.5 months. The follow-up ranged from observation of the infants to full developmental testing.

Twenty-seven of the above infants were tested formally between 15 to 71 months and found to have normal growth and development.[11,13] Two small controlled studies found that other tricyclic antidepressants in breastmilk also had no adverse effect on infant development.[14,15]

### Effects on Lactation and Breastmilk

Nortriptyline usually increases serum prolactin only slightly, but has caused galactorrhea in nonpregnant, nonnursing patients rarely.[16,17]

An observational study looked at outcomes of 2859 women who took an antidepressant during the 2 years prior to pregnancy. Compared to women who did not take an antidepressant during pregnancy, mothers who took an antidepressant during all 3 trimesters of pregnancy were 37% less likely to be breastfeeding upon hospital discharge. Mothers who took an antidepressant only during the third trimester were 75% less likely to be breastfeeding at discharge. Those who took an antidepressant only during the first and second trimesters did not have a reduced likelihood of breastfeeding at discharge.[18] The antidepressants used by the mothers were not specified.

A retrospective cohort study of hospital electronic medical records from 2001 to 2008 compared women who had been dispensed an antidepressant during late gestation (n = 575) to those who had a psychiatric illness but did not receive an antidepressant (n = 1552) and mothers who did not have a psychiatric diagnosis (n = 30,535). Women who received an antidepressant were 37% less likely to be breastfeeding at discharge than women without a psychiatric diagnosis, but no less likely to be breastfeeding than untreated mothers with a psychiatric diagnosis.[19] None of the mothers were taking nortriptyline.

In a study of 80,882 Norwegian mother-infant pairs from 1999 to 2008, new postpartum antidepressant use was reported by 392 women and 201 reported that they continued antidepressants from pregnancy. Compared with the unexposed comparison group, late pregnancy antidepressant use was associated with a 7% reduced likelihood of breastfeeding initiation, but with no effect on breastfeeding duration or exclusivity. Compared with the unexposed comparison group, new or restarted antidepressant use was associated with a 63% reduced likelihood of predominant, and a 51% reduced likelihood of any breastfeeding at 6 months, as well as a 2.6-fold increased risk of abrupt breastfeeding discontinuation. Specific antidepressants were not mentioned.[20]

### Alternate Drugs to Consider

Paroxetine, Sertraline

### References

1 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118-e26.30601177
2 Berle JØ, Steen VM, Aamo TO, et al. Breastfeeding during maternal antidepressant treatment with serotonin reuptake inhibitors: Infant exposure, clinical symptoms, and cytochrome P450 genotypes. J Clin Psychiatry 2004;65:1228-34.15367050
3 Weissman AM, Levy BT, Hartz AJ, et al. Pooled analysis of antidepressant levels in lactating mothers, breast milk, and nursing infants. Am J Psychiatry 2004;161:1066-78.15169695
4 Wisner KL, Parry BL, Piontek CM. Postpartum depression. N Engl J Med 2002;347:194-9.12124409
5 Brixen-Rasmussen L, Halgrener J, Jorgensen A. Amitriptyline and nortriptyline excretion in human breast milk. Psychopharmacology (Berl) 1982;76:94-5.6805016
6 Matheson I, Skjaeraasen J. Milk concentrations of flupenthixol, nortriptyline and zuclopenthixol and between-breast differences in two patients. Eur J Clin Pharmacol 1988;35:217-20.3191943
7 Breyer-Pfaff U, Nill K, Entenmann A, et al. Secretion of amitriptyline and metabolites into breast milk. Am J Psychiatry 1995;152:812-3.7726331
8 Wisner KL, Perel JM, Findling RL, et al. Nortriptyline and its hydroxymetabolites in breastfeeding mothers and newborns. Psychopharmacol Bull 1997;33:249-51.9230638
9 Mammen O, Perel JM, Wheeler S. Antidepressants and breast-feeding. Am J Psychiatry 1997;154:1174-5.9247422
10 Wisner KL, Perel JM. Serum nortriptyline levels in nursing mothers and their infants. Am J Psychiatry 1991;148:1234-6.1883004
11 Misri S, Sivertz K. Tricyclic drugs in pregnancy and lactation: A preliminary report. Int J Psychiatry Med 1991;21:157-71.1894455
12 Altshuler LL, Burt VK, McMullen M, et al. Breastfeeding and sertraline: A 24-hour analysis. J Clin Psychiatry 1995;56:243-5.7775366
13 Nulman I, Rovet J, Stewart DE, et al. Child development following exposure to tricyclic antidepressants or fluoxetine throughout fetal life: A prospective, controlled study. Am J Psychiatry 2002;159:1889-95.12411224
14 Buist A, Janson H. Effect of exposure to dothiepin and northiaden in breast milk on child development. Br J Psychiatry 1995;167:370-3.7496646
15 Yoshida K, Smith B, Craggs M, et al. Investigation of pharmacokinetics and possible adverse effects in infants exposed to tricyclic antidepressants in breast-milk. J Affect Disord 1997;43:225-37.9186793
16 Nielsen JL. Plasma prolactin during treatment with nortriptyline. Neuropsychobiology 1980;6:52-5.7366815
17 Kukreti P, Ali W, Jiloha RC. Rising trend of use of antidepressants induced non-puerperal lactation: A case report. J Clin Diagn Res 2016;10:VD01-VD2.27504388
18 Venkatesh KK, Castro VM, Perlis RH, et al. Impact of antidepressant treatment during pregnancy on obstetric outcomes among women previously treated for depression: An observational cohort study. J Perinatol 2017;37:1003-9.28682318
19 Leggett C, Costi L, Morrison JL, et al. Antidepressant use in late gestation and breastfeeding rates at discharge from hospital. J Hum Lact 2017;33:701-9.28984528
20 Grzeskowiak LE, Saha MR, Nordeng H, et al. Perinatal antidepressant use and breastfeeding outcomes: Findings from the Norwegian Mother, Father and Child Cohort Study. Acta Obstet Gynecol Scand 2022;101:344-54.35170756

## Substance Identification

### Substance Name

Nortriptyline

### CAS Registry Number

72-69-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidepressive Agents

Antidepressive Agents, Tricyclic